# Norepinephrine

CASRN: 51-41-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of norepinephrine during breastfeeding. Because of its poor oral bioavailability and short half-life, any norepinephrine in milk is unlikely to affect the infant. High intravenous doses of norepinephrine might reduce milk production or milk letdown as well as decrease the concentration of beta-casein in milk.

### Drug Levels

Maternal Levels. Eight nursing mothers collected breastmilk for analysis of norepinephrine. Milk norepinephrine levels ranged from 2.1 to 19.5 mcg/L (12.7 to 115.5 nanomolar). The norepinephrine in milk appears to be synthesized locally by mammary epithelial cells and actively secreted into milk.[1,2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Norepinephrine inhibits the synthesis of beta-casein via stimulation of adrenergic beta-2 receptors.[1] Animal data indicate that norepinephrine can decrease serum prolactin and reduce milk production,[3] as well as inhibit the release of oxytocin, which inhibits milk ejection.[4]

### References

1 Chiba T, Maeda T, Fujita Y, et al. Stress-induced suppression of milk protein is involved in a noradrenergic mechanism in the mammary gland. Endocrinology 2019;160:2074-84.31150047
2 Chiba T, Takaguri A, Maeda T. Norepinephrine transporter expressed on mammary epithelial cells incorporates norepinephrine in milk into the cells. Biochem Biophys Res Commun 2021;545:1-7.33529804
3 Thomas GB, Cummins JT, Doughton BW, et al. Direct pituitary inhibition of prolactin secretion by dopamine and noradrenaline in sheep. J Endocrinol 1989;123:393-402.2607250
4 Song SL, Crowley WR, Grosvenor CE. Evidence for involvement of an adrenal catecholamine in the beta-adrenergic inhibition of oxytocin release in lactating rats. Brain Res 1988;457:303-9.2851365

## Substance Identification

### Substance Name

Norepinephrine

### CAS Registry Number

51-41-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Agonists

Adrenergic Alpha-Agonists

Catecholamines

Sympathomimetics

Vasoconstrictor Agents